# Kratom

## Drug Levels and Effects

### Summary of Use during Lactation

Kratom (Mitragyna speciosa) is a tree native to tropical Southeast Asia. Kratom leaves contain psychoactive substances that produce analgesic, euphoric and stimulant effects. The best studied of these substances are mitragynine and 7-hydroxymitragynine. Both have partial mu- and kappa-opioid agonist properties. Corynantheidine is another ingredient with high affinity for adrenergic receptors. Many other chemically similar substances with similar effects have been identified in kratom leaves.

Cases of opioid withdrawal syndrome necessitating opioid replacement treatment have been reported in newborn infants whose mothers used kratom during pregnancy.[1-6] Little information is available on the use of kratom during breastfeeding. There is some suggestion that breastfeeding might help lessen neonatal withdrawal symptoms, although it should not be expected to replace direct opioid replacement treatment of the withdrawing infant.[3-5] Withdrawal symptoms can occur in breastfed infants when maternal administration of an opioid analgesic is stopped, or when breastfeeding is stopped. Nursing mothers should generally avoid using kratom due to unknown infant health effects from exposure to multiple central nervous system acting substances in breastmilk.

### Drug Levels

The main psychoactive substance in kratom leaves is mitragynine, which has a bioavailability estimated to be about 21% and a half-life of 3 to 9 hours.[7]

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

An infant was born to a mother who took kratom tea 3 to 4 times daily (dose not specified), acetaminophen, methocarbamol, diphenhydramine, valacyclovir, ranitidine, loratadine, albuterol and a low dose of citalopram during pregnancy. She rapidly discontinued kratom in the hospital and was discharged after 7 days. Her infant was breastfed frequently, but was noted to be jittery and to have increased tone with handling within 6 to 8 hours of birth. The infant was admitted to the NICU for irritability, sleeplessness between feeds and excessive sucking at 22 hours of age and was treated with morphine for narcotic withdrawal. She was discharged home on day 12 on oral morphine. At 1 month of age, she continued to be irritable with stretches of prolonged crying, mostly during the daytime, but was feeding well and gaining weight. The time necessary to wean her off morphine was slightly longer than 2 months. This prolonged withdrawal syndrome in the infant might be as a result of sustained in utero exposure.[4] In this case, breastfeeding did not appear to be helpful in eliminating kratom withdrawal symptoms, even when the mother was still taking kratom.

A woman was taking 18 to 20 grams of kratom powder 3 times daily throughout her pregnancy for back pain and mood disorder. She delivered a female infant at 37 weeks and 5 days. On postpartum day 2 the infant developed feeding intolerance, jitteriness, irritability, and emesis. The infant was transferred to the NICU and treated for neonatal opioid withdrawal with a continuous intravenous morphine infusion up to a maximum dose of 10 mcg/kg per hour. By postpartum day 7 the morphine had been converted to the oral route, and then stopped. The infant was transferred back to care with her mother and began breastfeeding shortly thereafter. Meanwhile, on postpartum day 2 the mother began weaning off kratom and was also started on 10 mg of oral morphine 3 times daily. Her morphine and kratom doses were then alternatingly decreased until she was no longer taking either substance after 4 weeks. No further neonatal opioid withdrawal symptoms were reported during this time.[3] The combination of breastfeeding with maternal kratom and morphine use might have helped alleviate the infant’s withdrawal syndrome.

An infant was born to a mother who was taking kratom in an unspecified dose during pregnancy. The mother had a negative urine drug screen on admission indicating that no other opioids were used just prior to delivery. The infant was breast- and bottle-fed. On postnatal day 1, the infant developed increased fussiness, jitteriness, sneezing, increased respiratory rate, and poor feeding, but symptoms were mild and did not require opioid treatment.[5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Trakulsrichai S, Tongpo A, Sriapha C, et al. Kratom abuse in Ramathibodi Poison Center, Thailand: A five-year experience. J Psychoactive Drugs 2013;45:404–8.24592666
2 Eldridge WB, Foster C, Wyble L. Neonatal opioid withdrawal syndrome due to maternal kratom use. Pediatrics 2018;142:e20181839.30404789
3 Mackay L, Abrahams R. Novel case of maternal and neonatal kratom dependence and withdrawal. Can Fam Physician 2018;64:121–2.29449242
4 Murthy P, Clark D. An unusual cause for neonatal opioid withdrawal syndrome. Paediatr Child Health 2019;24:12–4.30792593
5 Love JS, Moss MJ, Thompson JA, et al. A case series of maternal kratom use and newborns with neonatal opioid withdrawal symptoms. J Med Toxicol 2020;16:166. doi:10.1007/s13181-020-00759-7
6 Wright ME, Ginsberg C, Parkison AM, et al. Outcomes of mothers and newborns to prenatal exposure to kratom: A systematic review. J Perinatol 2021;41:1236–43.33589723
7 Ya K, Tangamornsuksan W, Scholfield CN, et al. Pharmacokinetics of mitragynine, a major analgesic alkaloid in kratom (Mitragyna speciosa): A systematic review. Asian J Psychiatr 2019;43:73–82.31100603

## Substance Identification

### Substance Name

Kratom

### Scientific Name

Mitragyna speciosa Korth

### Drug Class

Breast Feeding

Lactation

Milk, Human

Phytotherapy

Plants, Medicinal

Analgesics, Opioid

Narcotics